# Roflumilast

CASRN: 162401-32-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of roflumilast in nursing mothers. The drug and its metabolite are more than 97% bound to plasma proteins, so amounts in milk are likely to be very low. However, the manufacturer and some experts recommend that the oral drug should not be used by women who are nursing.[1] Topical products are unlikely to affect the infant but should be applied to the smallest area of skin and for the shortest duration possible while breastfeeding. To avoid direct infant exposure, do not apply roflumilast directly to the nipple or areola. If applied to the patient's chest, avoid exposure via direct contact with the infant's skin.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651-68.38280680

## Substance Identification

### Substance Name

Roflumilast

### CAS Registry Number

162401-32-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Phosphodiesterase 4 Inhibitors